# Ganaxolone

CASRN: 38398-32-2

## Drug Levels and Effects

### Summary of Use during Lactation

No published information is available on the clinical use of ganaxolone during breastfeeding. However, a study by the manufacturer indicates that amounts in breastmilk appear to be low and would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. The manufacturer reports that a study was conducted in 5 healthy adult lactating women treated with a single 300 mg oral dose of ganaxolone. The calculated maximum relative infant dose for ganaxolone was approximately 0.157 mg/kg daily based on an average milk intake of 150 mL/kg daily, which is less than 1% of the maternal dose, and approximately 0.24% the labeled pediatric dose of 63 mg/kg/day.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Ganaxolone

### CAS Registry Number

38398-32-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants

GABA Agents